# Paltusotine

CASRN: 2172870-89-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of paltusotine during breastfeeding. Because paltusotine is 99% bound to plasma proteins, the amount in milk is likely to be low. If a mother requires paltusotine, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Paltusotine

### CAS Registry Number

2172870-89-0

### Drug Class

Breast Feeding

Lactation

Milk, Human